# Periciazine

CASRN: 2622-26-6

## Drug Levels and Effects

### Summary of Use during Lactation

Propericiazine and its active metabolite periciazine are not approved for marketing in the United States by the U.S. Food and Drug Administration, but are available in other countries. Minimal information from one patient indicates that the amount of periciazine is low in milk after administration of propericiazine. If propericiazine or periciazine is required by the mother, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Propericiazine is metabolized to the active drug, periciazine in the body.

Maternal Levels. A woman with dissociative disorder and persistent dysthymic depression was treated during pregnancy with brotizolam 0.25 mg daily, propericiazine 10 mg daily, and zolpidem 5 mg daily. Zolpidem was discontinued at week 28 and sulpiride 100 mg daily was begun at week 33. Milk samples taken at 7.5 and 11.5 hours after the previous dose on day 9 postpartum contained 0.3 and 0.1 mcg/L of periciazine, respectively.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Saito J, Tachibana Y, Wada YS, et al. (2022). Transfer of brotizolam, periciazine, and sulpiride in cord blood and breast milk, and alprazolam in breast milk: A case report. J Pharm Health Care Sci.

## Substance Identification

### Substance Name

Periciazine

### CAS Registry Number

2622-26-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Phenothiazines